# Dexrazoxane

CASRN: 24584-09-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dexrazoxane during breastfeeding. The manufacturer recommends that women not breastfeed during treatment and for 2 weeks following the final dose of dexrazoxane. However, because dexrazoxane is used with doxorubicin, the abstinence period might be longer, depending on the doxorubicin dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dexrazoxane

### CAS Registry Number

24584-09-6

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Cardioprotectants

Cardiotonic Agents

Enzyme Inhibitors

Topoisomerase II Inhibitors